# Yellow Fever Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

The yellow fever virus and vaccine can be transmitted into breastmilk although the frequency of transmission is unclear.[1-3] In one group of 11 women who were inadvertently vaccinated, none had detectable yellow fever vaccine RNA in their milk.[4] In another study of 8 women, vaccine RNA was found in several milk samples for 11 to 24 days after vaccination. Yellow fever encephalitis has been reported in breastfed newborns whose mothers received yellow fever vaccine. Breastfeeding should be avoided for 10 to 14 days after a vaccination except in situations where exposure to yellow fever viruses cannot be avoided or postponed. Infants under 6 months appear to be at an increased risk of encephalitis from the vaccine and should not be vaccinated. Infants over 9 months of age should be vaccinated themselves if they will be traveling with their mother to a yellow-fever endemic area.[5-7] Exposure to yellow fever vaccine via breastmilk should not increase the risk to an infant who also receives the vaccination.

### Drug Levels

Maternal Levels. Eleven nursing mothers were inadvertently vaccinated with the 17DD strain of yellow fever vaccine (Fiocruz, Brazil). Milk samples were obtained on days 8, 10 and 15 after administration. None of the samples contained detectable yellow fever vaccine RNA. One mother’s serum was positive for yellow fever IgM on day 8 after the vaccine administration.[4]

Eight Sudanese nursing mothers received the yellow fever vaccine (17DD, Bio-Manguinhos/Fiocruz) within 9 months of delivery. Milk specimens were collected by hand expression while the infant was nursing on the opposite breast. The specimens from the right and left breasts were expressed into separate containers. Collection of milk specimens performed on four occasions: the first collection time was 3-14 days from the date of the vaccination. The three following collections were 3-4 days apart. All 8 women participated in the first collection, 6 in the second, 4 in the third, and 3 in the fourth collection. In the first collection, 5 mothers’ milk contained IgM antibodies against the vaccine and milk from 3 women contained yellow fever vaccine (YFV) RNA. In the second collection 4 of 6 samples contained YFV RNA. In the third collection, 1 of 4 milk samples contained YFV RNA. In the fourth collection, none of the three milk samples contained YFV RNA. The minimal clearance time of the viral RNA in milk was 11 days after vaccination and the maximum was 24 days after vaccination.[8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A review article reports three Nigerian breastfed neonates 10 days, 23 days and 5 weeks whose mothers received the 17D vaccine during first month of infant’s life. Each infant developed encephalitis. Other details are not provided.[9]

One probable case of yellow fever vaccine-associated neurologic disease (YEL-AND) was reported in a 38-day-old infant whose mother was vaccinated 24 days earlier with the Brazilian-manufactured yellow fever vaccine 17D (probably the 17-DD strain). The infant was exclusively breastfed. Although it was not possible to determine if the breast milk was the mode of transmission, no other plausible cause was identified.[10]

A woman who was exclusively nursing her newborn received 17DD yellow fever vaccine on day 15 postpartum. Eight days later her infant developed fever, irritability and refused to nurse. One day later, the infant developed seizure-like activity. The infant was hospitalized and had periods of somnolence and irritability and required intravenous anticonvulsants to control seizures. An MRI was consistent with encephalitis. Yellow fever-specific IgM antibodies were detected in serum and CSF. Laboratory examination of the infant’s cerebrospinal fluid confirmed the presence of a viral strain identical to the vaccine. This was the first case of laboratory-confirmed, breastfeeding-associated transmission of 17DD yellow fever vaccine virus from a recently vaccinated mother.[5]

A Canadian mother had received a yellow fever vaccination (probably the 17D-204 strain) when her breastfed (extent not stated) infant was 10 days of age. At 5 weeks of age, the infant developed focal seizures on alternating sides, poor appetite, and vomiting following a 2-day history of fever and irritability. The infant’s serum was positive for yellow fever, and the cerebrospinal fluid was positive for yellow fever antigen, but negative for yellow fever virus. Although the authors could not entirely rule out other causes, they judged the adverse reaction to probably be caused by yellow fever vaccine transmitted via breastmilk to the infant.[1]

Eleven nursing mothers were inadvertently vaccinated with the 17DD strain of yellow fever vaccine (Fiocruz, Brazil). Some of the infants had been breastfed before the error was discovered. Breastfeeding was discontinued and all infants were placed on formula for 10 days. The infants were followed for 28 days by a pediatrician, but no symptoms were seen in any of the infants.[4]

A mother who was breastfeeding her 1-year-old received her first dose of yellow fever vaccine and continued to nurse her infant. Seven days after the mother’s vaccination, the infant exhibited nasal discharge, headache, fever, anorexia, malaise and dehydration. Computed tomography (CT) of the brain showed no abnormalities, and CSF analysis indicated 230 leukocytes/cu mm, 12 erythrocytes/cu mm, and 35 mg/dL protein. The infant was discharged 9 days after admission. The authors considered this an atypical aseptic meningitis caused by yellow fever vaccine.[11]

A manufacturer’s pharmacovigilance study of patients exposed to yellow fever vaccine (Stamaril, 17D-204 strain) identified two infants exposed via breastmilk, although both were also immunized with the vaccine along with the mother. Neither had a serious adverse effect, but one 9-month-old had a non-serious heat rash that lasted 2 days. The other infant, a 2-year-old, also vaccinated along with the mother, was diagnosed with hand, foot, mouth disease 26 days after vaccination. Both these events were assessed as not related to the study vaccine.[12]

Eight Sudanese nursing mothers received the YFV (17DD) yellow fever vaccine (Bio-Manguinhos/Fiocruz) within 9 months of delivery. Their infants (ages from 45 days to 8 months) developed symptoms of fever, diarrhea, jaundice, vomiting, and/or skin rashes after one week from when their mothers received the vaccines.[8]

A mother in Japan received a dose of the 17D-204 yellow fever vaccine. She breastfed her infant once, 2 days after receiving the vaccine. No adverse events were seen in the infant.[13]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kuhn S, Twele-Montecinos L, MacDonald J, . Case report: Probable transmission of vaccine strain of yellow fever virus to an infant via breast milk. CMAJ 2011;183:E243-5.21324845
2 Ribeiro AF, Brasil LMCR, Prada RM, . Detection of wild-type yellow fever virus in breast milk. Pediatr Infect Dis J 2020;39:68-9.31725551
3 Pascard J, Desgraupes S, Chiche A, . In vivo risk assessment of yellow fever virus transmission through breastfeeding, and mechanistic insights. J Infect Dis 2026;233:e1056-e68.41406164
4 Fernandes EG, Nogueira JS, Porto VBG, . The search for yellow fever virus vaccine in breast milk of inadvertently vaccinated women in Brazil. Rev Inst Med Trop Sao Paulo 2020;62:e33.32491144
5 Centers for Disease Control and Prevention (CDC). Transmission of yellow fever vaccine virus through breast-feeding - Brazil, 2009. MMWR Morb Mortal Wkly Rep 2010;59:130-2.20150888
6 Gershman M, Staples JE. Yellow fever. In, CDC Yellow Book 2024. https://wwwnc.cdc.gov/travel/yellowbook/2024/infections-diseases/yellow-fever
7 Santangelo OE, Pizzamiglio AS, Carlotta V. A systematic review on yellow fever vaccine and adverse events. Glob Health Epidemiol Genom 2026;2026:2016905.42411915
8 Hassan T, Bashir RA, Abdelrahman DN, . Transmission of yellow fever vaccine virus from breast feeding mothers to their infants: reporting of yellow fever virus (YFV) RNA detection in milk specimens. F1000Research 2022;11:76.38106444
9 Thomas RE, Lorenzetti DL, Spragins W, . The safety of yellow fever vaccine 17D or 17DD in children, pregnant women, HIV+ individuals, and older persons: Systematic review. Am J Trop Med Hyg 2012;86:359-72.22302874
10 Traiber C, Amaral PC, Ritter VR, . Infant meningoencephalitis probably caused by yellow fever vaccine virus transmitted via breastmilk. J Pediatr (Rio J) 2011;87:269-72.21461453
11 Ribeiro AF, Guedes BF, Sulleiman Jmah, . Neurologic disease after yellow fever vaccination, São Paulo, Brazil, 2017-2018. Emerg Infect Dis 2021;27:1577-87.34014156
12 Rojas A, Hachey W, Kaur G, . Enhanced safety surveillance of STAMARIL^®^ yellow fever vaccine provided under the expanded access investigational new drug program in the United States. J Travel Med 2023;30:taad037.37000007
13 Miyazato Y, Terada M, Ujiie M, . A nationwide prospective cohort study on safety of the 17D-204 yellow fever vaccine during a vaccine shortage in Japan. J Travel Med 2023;30:taac070.35640301

## Substance Identification

### Substance Name

Yellow Fever Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines